# Leniolisib

CASRN: 1354690-24-6

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the clinical use of leniolisib during breastfeeding. Because leniolisib is 94.5% bound to plasma proteins, the amount in milk is likely to be low. The manufacturer recommends that breastfeeding be discontinued during leniolisib therapy and for 1 week after the last dose.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

## Substance Identification

### Substance Name

Leniolisib

### CAS Registry Number

1354690-24-6

### Drug Class

Breast Feeding

Lactation

Milk, Human

Enzyme Inhibitors

Protein Kinase Inhibitors

Signal Transduction Inhibitors